# Rubella Vaccine

## Drug Levels and Effects

### Summary of Use during Lactation

Vaccines given to a nursing mother do not affect the safety of breastfeeding for mothers or infants and that breastfeeding is not a contraindication to rubella vaccine. Breastfed infants should be vaccinated according to the routine recommended schedules. Although rubella vaccine virus might be excreted into milk, the virus usually does not infect the infant. If an infection does occur, it is well tolerated because the viruses are attenuated.[1-3]

### Drug Levels

Maternal Levels. Early studies found no transmission of rubella virus to breastfed infants. None of 18 infants who were breastfed after maternal vaccination with rubella vaccine (various strains) had detectable antibodies in one study.[4]

Another study of two strains of rubella vaccine (HPV -77 DE5 and RA 27 /3) given by subcutaneous injection or intranasal inhalation found infectious rubella virus or virus antigen in the breastmilk of 8 of the 13 women.[5]

A study of mothers vaccinated with the Cendehill strain of live, attenuated rubella virus found no transmission of the live virus to their breastfed infants.[6] However, rubella vaccine virus can appear in breastmilk and result in infections in some infants.[7-9] See "Effects In Breastfed Infants" below.

In a prospective study, 169 mothers with low titers or either measles or rubella were given MR vaccine (Schwarz FF-8 strain/TO-336 strain; Takeda Pharmaceutical Co. Ltd, Osaka, Japan) at their 1-month postnatal checkup. Mothers provided 5 mL of breastmilk 2 weeks later. Rubella virus antigen was not detected in the breastmilk of any mothers.[10]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Limited data indicate that breastfeeding can enhance the response of the infant to certain vaccine antigens.[2,11]

A paper reported on 511 women who received rubella vaccine in the immediate postpartum period. Three strains were studied: Cendehill (n = 210), HPV-77 DE-5 (Meruvax; n = 182) and RA 27/3 (n = 119). Sixty-three infants, 67% of whom were breastfed, were studied at 2 to 8 months of age. None of them had any evidence of side effects or seroconversion from maternal vaccination.[12]

One 12-day-old breastfed infant developed a rubella infection 11 days after maternal vaccination with live rubella vaccine.[13] However, it is questionable if maternal vaccination was the cause of the infant's infection.[14]

Another breastfed infant had live rubella vaccine virus isolated from a throat swab after maternal immunization. The infant did not demonstrate seroconversion or adverse reactions.[7]

Some breastfed infants acquire passive immunity to rubella after maternal vaccination as do infants of mothers with natural rubella immunity. However, neither group of infants has a decreased response to rubella vaccine administered to the infant at 15 to 18 months of age.[8]

After immunization of their mothers with rubella vaccine, 25% of breastfed infants in one study showed transient seroconversion to rubella virus (RA 27/3 strain), but without any clinical disease.[9]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Gruslin A, Steben M, Halperin S, et al. Immunization in pregnancy: No. 220, December 2008. Int J Gynaecol Obstet 2009;105:187–91.19367691
2 Kroger A, Bahta L, Long S, et al. CDC. General Best Practices for Immunization. 2024. https://www.cdc.gov/vaccines/hcp/acip-recs/general-recs/index.html
3 Jamieson DJ, Munoz FM, Rasmussen SA. Maternal immunization. Obstet Gynecol 2026;147:661–78.41712936
4 Isacson P, Kehrer AF, Wilson H, et al. Comparative study of live, attenuated rubella virus vaccines during immediate puerperium. Obstet Gynecol 1971;37:332–7.5101211
5 Losonsky GA, Fishaut JM, Strussenberg J, et al. Effect of immunization against rubella on lactation products. I. Development and characterization of specific immunologic reactivity in breast milk. J Infect Dis 1982;145:654–60.7077089
6 Farquhar JD. Follow-up on rubella vaccinations and experience with subclinical reinfection. J Pediatr 1972;81:460–5.5065683
7 Buimovici-Klein E, Hite RL, Byrne T, et al. Isolation of rubella virus in milk after pospartum immunization. J Pediatr 1977;91:939–41.925824
8 Krogh V, Duffy LC, Wong D, et al. Postpartum immunization with rubella virus vaccine and antibody response in breast-feeding infants. J Lab Clin Med 1989;113:695–9.2732617
9 Losonsky GA, Fishaut JM, Strussenberg J, et al. Effect of immunization against rubella on lactation products. II. Maternal-neonatal interactions. J Infect Dis 1982;145:661–6.7077090
10 Hisano M, Kato T, Inoue E, et al. Evaluation of measles-rubella vaccination for mothers in early puerperal phase. Vaccine 2016;34:1208–14.26801065
11 Pabst HF. Immunomodulation by breast-feeding. Pediatr Infect Dis J 1997;16:991–5.9380478
12 Grillner L, Hedstrom CE, Bergstrom H, et al. Vaccination against rubella of newly delivered women. Scand J Infect Dis 1973;5:237–41.4798559
13 Landes RD, Bass JW, Millunchick EW, et al. Neonatal rubella following postpartum maternal immunization. J Pediatr 1980;97:465–7.7191002
14 Lerman SJ. Neonatal rubella following maternal immunization. J Pediatr 1981;98:668–9.7205504

## Substance Identification

### Substance Name

Rubella Vaccine

### Drug Class

Breast Feeding

Lactation

Milk, Human

Vaccines